# Ceftolozane and Tazobactam

CASRN: 1613740-46-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of ceftolozane-tazobactam during breastfeeding. No serious adverse effects have been reported for other cephalosporin antibiotics during breastfeeding. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Ceftolozane-tazobactam is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ceftolozane and Tazobactam

### CAS Registry Number

1613740-46-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins